# Clozapine

CASRN: 5786-21-0

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with clozapine during breastfeeding, and sedation and adverse hematologic effects have been reported in breastfed infants, other agents are preferred.[1-3] Although breastfeeding is not contraindicated during clozapine use, some sources recommend that women taking clozapine not breastfeed if clozapine is required.[4-6] If breastfeeding is undertaken by a mother who is taking clozapine, close monitoring of the infant for excessive sedation and periodic monitoring of the infant's white blood cell count is advisable.

### Drug Levels

Maternal Levels. A woman taking oral clozapine 50 mg daily had a milk clozapine level of 63.5 mcg/L one day postpartum. At 3 days postpartum, her dose was increased to 100 mg daily and at 7 days postpartum, clozapine in milk was 115.6 mcg/L. Her infant was not breastfed and timing of the samples with respect to the doses was not stated.[7]

Infant Levels. One woman who took clozapine 100 mg daily in late pregnancy and postpartum partially breastfed her infant for 5 days. The umbilical cord blood clozapine concentration was 56% of the mother's plasma level at birth and infant's serum concentration was 6.5% of the mothers at 33 hours postpartum, implying no drug accumulation, but the timing of the sample with respect to the times of the dosage and nursing was not reported.[8]

### Effects in Breastfed Infants

Among 4 infants who were breastfed by mothers taking clozapine, 1 infant experienced drowsiness and 1 infant experienced agranulocytosis possibly caused by clozapine. Details of the cases are lacking.[9]

A healthy female infant was born to a mother who took clozapine 100 mg daily throughout pregnancy and lactation. She was breastfed (extent not stated) up to 1 year of age. The infant developed normally except for speech which was delayed considerably. She did not achieve normal, fluent speech until the age of 5 years. The delayed speech development was possibly related to clozapine in breastmilk, but it could have been the result of exposure to the drug during gestation or could have been unrelated to clozapine.[10]

One woman who took clozapine 100 mg daily in late pregnancy and postpartum partially breastfed her infant for 5 days. No neurodevelopmental disorders were detected in the infant after 32 months of follow-up.[8]

A woman with schizophrenia gave birth and breastfed twice while taking clozapine. The first time, she and the family reported no negative effects on the infant. On the second occasion, she was followed by psychiatrists. She gave birth while taking clozapine 100 mg daily. It was slowly tapered, and olanzapine was begun and titrated to a dose of 20 mg daily. Because of hallucinations, clozapine was restarted and titrated to a dose of 50 mg daily while continuing to breastfeed. Regular follow-up over a year by a pediatrician indicated no agranulocytosis, seizures or neurodevelopmental disorders.[11]

A woman with schizophrenia took clozapine 75 mg daily during pregnancy and postpartum. The woman breastfed (extent not stated) her infant. The infant was followed for 6 months, examined monthly by a pediatrician and had hemograms every 2 weeks. No hematologic or other adverse reactions were seen during this time and the mother noted no adverse effects in the infant.[12]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[13] The number of women taking clozapine was not reported.

A retrospective review of patients in one institution in north India found that of 9 women who received clozapine during pregnancy, three partially breastfed their infants postpartum. No hematological or other adverse outcomes occurred in the infants. Follow-up at a mean of 8.9 months (range 1 to 18 months) found growth to be normal.[14]

### Effects on Lactation and Breastmilk

Unlike the phenothiazines, clozapine has a minimal effect on maternal serum prolactin levels.[15,16] However, a woman who had been taking clozapine plus high-dose haloperidol developed hyperprolactinemia and severe galactorrhea 2 weeks after stopping haloperidol and 4 days after starting valproic acid. A dose of cabergoline normalized her serum prolactin and galactorrhea ceased for the following 2 months of observation.[17]

The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[13] The number of women taking clozapine was not reported.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Uguz F. Second-generation antipsychotics during the lactation period: A comparative systematic review on infant safety. J Clin Psychopharmacol 2016;36:244–52.27028982
2 Larsen ER, Damkier P, Pedersen LH, et al. Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1–28.26344706
3 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
4 Hasan A, Falkai P, Wobrock T, et al. World Federation of Societies of Biological Psychiatry (WFSBP) Guidelines for Biological Treatment of Schizophrenia. Part 3: Update 2015 management of special circumstances: Depression, suicidality, substance use disorders and pregnancy and lactation. World J Biol Psychiatry 2015;16:142–70.25822804
5 Pacchiarotti I, Leon-Caballero J, Murru A, et al. Mood stabilizers and antipsychotics during breastfeeding: Focus on bipolar disorder. Eur Neuropsychopharmacol 2016;26:1562–78.27568278
6 McAllister-Williams RH, Baldwin DS, Cantwell R, et al. British Association for Psychopharmacology consensus guidance on the use of psychotropic medication preconception, in pregnancy and postpartum 2017. J Psychopharmacol 2017;31:519–52.28440103
7 Barnas C, Bergant A, Hummer M, et al. Clozapine concentrations in maternal and fetal plasma, amniotic fluid, and breast milk. Am J Psychiatry 1994;151:945.8185013
8 Imaz ML, Oriolo G, Torra M, et al. Clozapine use during pregnancy and lactation: A case-series report. Front Pharmacol 2018;9:264.29636684
9 Dev VJ, Krupp P. Adverse event profile and safety of clozapine. Rev Contemp Pharmacother 1995;6:197–208.
10 Mendhekar DN. Possible delayed speech acquisition with clozapine therapy during pregnancy and lactation. J Neuropsychiatry Clin Neurosci 2007;19:196–7.17431071
11 Uygur OF, Uygur H. Neurodevelopmental and growth follow-up of the baby exposed to antipsychotics during pregnancy and lactation: A case report. Psychiat Clin Psychopharmacol 2019;29:744–7. doi:10.1080/24750573.2019.1627695
12 Uguz F. The use of clozapine during pregnancy and lactation: A case report. Psychiat Clin Psychopharmacol 2020;30:193–5. doi:10.5455/pcp.20200502080433
13 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511–6.34318375
14 Grover S, Gupta S. Use of clozapine in pregnancy: A retrospective study from north India. J Clin Psychopharmacol 2025;45:353–5.40338526
15 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56–62.11913677
16 Bergemann N, Mundt C, Parzer P, et al. Plasma concentrations of estradiol in women suffering from schizophrenia treated with conventional versus atypical antipsychotics. Schizophr Res 2005;73:357–66.15653282
17 Conca A, Waler M, Walpoth M, et al. A case of delayed galactorrhoea as an adverse event of overlapping haloperidol and clozapine administration. Int J Neuropsychopharmacol 2005;8:303–5.15850503

## Substance Identification

### Substance Name

Clozapine

### CAS Registry Number

5786-21-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents